# Eszopiclone

CASRN: 138729-47-2

## Drug Levels and Effects

### Summary of Use during Lactation

No data are available on the use of eszopiclone during breastfeeding. Data from the racemate, zopiclone, indicate that occasional use while breastfeeding an older infant should pose little risk to the infant. A safety scoring system finds zopiclone possible to use during breastfeeding,[1] but the infant should be monitored for sedation, poor feeding and poor weight gain.[2] An alternate hypnotic may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Eszopiclone is the S-isomer of zopiclone which is a racemic mixture containing 50% S- and 50% R-eszopiclone. In the United States, the recommended dose of eszopiclone is 2 mg compared with the dose of 7.5 mg of zopiclone used in Europe.

Maternal Levels. Three nursing women (time postpartum not stated) received a single oral dose of zopiclone 7.5 mg. Peak milk levels of about 55 mcg/L occurred about 2 hours after the dose. The half-life in milk was similar to that in plasma which was 5.3 hours in healthy adults.[3,4]

Twelve nursing mothers who were 2 to 6 days postpartum were given a single oral dose of 7.5 mg of zopiclone. The peak milk level averaged 34 mcg/L (range 24 to 57 mcg/L) and it occurred 2.4 hours (range 1 to 6 hours) after the dose. The mean half-life in milk was 5.3 hours (range 3.5 to 8.6 hours). The authors estimated that an exclusively breastfed infant would receive an average of 15 mcg/kg or 1.2 to 1.4% of the maternal weight-adjusted dosage of zopiclone.[2]

A woman took zopiclone 3.75 mg 4 times daily during pregnancy and postpartum for tension headaches. At 2 weeks postpartum, 2 hours after the second dose of the day, milk zopiclone levels ranged from 2.4 to 47.3 mcg/L and daily zopiclone excretion in the milk was estimated to be 3 mcg for a production of 335 mL. The weight-adjusted maternal dosage was estimated to be 3.2%.[5]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

In 12 mothers who were 2 to 6 days postpartum and took 7.5 mg of zopiclone, infant breastfeeding was interrupted for 8 to 10 hours before resuming. No unusual effect were noted in the infants.[2]

Thirty-week preterm twins were born to a mother who took zopiclone 3.75 mg 4 times daily for tension headache during pregnancy. They developed withdrawal symptoms during the first week of life. Beginning at 2 weeks of age, they were about two-thirds breastfed by their mother who continued the drug at the same dose. The infants had no clinical abnormalities and were discharged from the hospital 6 weeks after birth.[5]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Zaleplon, Zolpidem

### References

1 Uguz F. A new safety scoring system for the use of psychotropic drugs during lactation. Am J Ther 2021;28:e118-e26.30601177
2 Matheson I, Sande HA, Gaillot J. The excretion of zopiclone into breast milk. Br J Clin Pharmacol 1990;30:267-71.2206788
3 Gaillot J, Heusse D, Hougton GW, et al. Pharmacokinetics and metabolism of zopiclone. Int Pharmacopsychiatry 1982;17 (Suppl 2):76-91.7188377
4 Gaillot J, Heusse D, Hougton GW, et al. Pharmacokinetics and metabolism of zopiclone. Pharmacology 1983;27 (Suppl 2):76-91.6669634
5 Mathieu O, Masson F, Thompson MA, et al. Case report: In utero exposure and safe breastfeeding in two premature twins of a chronically treated mother with high doses of zopiclone. Fundam Clin Pharmacol 2010;24 (Suppl. S1):424. doi:10.1111/j.1472-8206.2010.00819.x

## Substance Identification

### Substance Name

Eszopiclone

### CAS Registry Number

138729-47-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Hypnotics and Sedatives